# Filgotinib

CASRN: 1206161-97-8

## Drug Levels and Effects

### Summary of Use during Lactation

Filgotinib is not approved in the US by the Food and Drug Administration. No information is available on the clinical use of filgotinib during breastfeeding. The European manufacturer and an expert opinion recommend that breastfeeding be discontinued during filgotinib therapy.[1-3]

### Drug Levels

Filgotinib is primarily metabolized to GS-829845, an active metabolite that has about 10% the activity of filgotinib.

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Selinger C, Laube R, Limdi JK, et al. Appropriateness of small molecule agents for patients with IBD of childbearing age - a RAND/UCLA appropriateness panel. Therap Adv Gastroenterol 2024;17:17562848241299737.39539488
2 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311
3 Mahadevan U, Seow CH, Barnes EL, et al. Global consensus statement on the management of pregnancy in inflammatory bowel disease. Clin Gastroenterol Hepatol 2025;23 (11S):S1–S60.40874901

## Substance Identification

### Substance Name

Filgotinib

### CAS Registry Number

1206161-97-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors

Janus Kinase Inhibitors

JAK Inhibitors